# Remibrutinib

CASRN: 1787294-07-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of remibrutinib during breastfeeding. Because remibrutinib is more than 95% bound to plasma proteins, and is rapidly cleared with a half-life of less than 2 hours, the amount in milk is likely to be low. If a mother requires remibrutinib, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Remibrutinib

### CAS Registry Number

1787294-07-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Allergic Agents

Enzyme Inhibitors

Protein Kinase Inhibitors

Signal Transduction Inhibitors

Tyrosine Kinase Inhibitors